# Rhubarb

CASRN: 90106-29-9

## Drug Levels and Effects

### Summary of Use during Lactation

Rhubarb (Rheum officinale, Rheum palmatum) root contains anthraquinones (e.g., aloe-emodin, chrysophanol, emodin, rhein), which are cathartics, and tannins, which are astringents. Rhubarb has no specific lactation-related uses. It has been used for a wide variety of conditions, such as constipation, chronic renal failure, and upper gastrointestinal bleeding. It has also been used topically for conditions, such as herpes infections, and gingivitis. Most of these conditions are not supported by well-controlled trials. Other species of rhubarb are used primarily as foods. Chinese and garden rhubarb are "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. Two very old studies found that laxative doses of rhubarb given to nursing mothers did not appear to pass into milk or affect their breastfed infants.[1] Nevertheless, most recent reviewers state that rhubarb should not be used during breastfeeding because of possible cathartic effects on the breastfed infants.[2,3] Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. After administration of 9.3 mL of rhubarb syrup to 9 nursing mothers, anthraquinones were undetectable (<220 mg/L of rhubarb using a colorimetric method) in breastmilk collected over 20 hours. The authors also cite a previous study that found no detectable aloes in the milk of mothers given rhubarb using an ultraviolet fluorescent assay. In both studies, laxative principles were detectable in breastmilk after other anthraquinone-containing laxatives were administered to nursing mothers.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In an old uncontrolled study, 9 nursing mothers were given 9.2 mL of rhubarb syrup on day 5 postpartum and each successive evening until discharge. Although all of the mothers had a laxative effect from this regimen, none of their breastfed infant had any noticeable laxative effects.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Bisacodyl, Magnesium Hydroxide, Senna

### References

1 Tyson RM, Shrader EA, Perlman HH. Drugs transmitted through breast milk. Part I: Laxatives. J Pediatr 1937;11:824-32. doi:10.1016/S0022-3476(37)80040-2
2 Nice F, Coghlan RJ, Birmingham BT. Which herbals are safe to take while breastfeeding? Here's a guide to popular herbs and their potential risk to nurslings. US Pharm 2000;25:1-9.
3 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93-100.

## Substance Identification

### Substance Name

Rhubarb

### Scientific Name

Rheum officinale; Rheum palmatum

### CAS Registry Number

90106-29-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cathartics

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal